# Ibrexafungerp

CASRN: 1207753-03-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ibrexafungerp during breastfeeding. However, the amounts in milk are low and unlikely to affect the breastfed infant. If ibrexafungerp is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more data become available, use caution especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. The manufacturer reports a milk-only pharmacokinetic lactation study that evaluated concentrations of ibrexafungerp in the plasma and breast milk of 5 healthy lactating women, who were between 33 and 346 days postpartum. Two oral doses of 300 mg of ibrexafungerp were administered 12 hours apart for one day. Ibrexafungerp was detected in breastmilk with a median peak concentration of 72.22 mcg/L (range 32.1 to 94.1 mcg/L) in the 2- to 4- hour milk collection and an average concentration of 45.39 mcg/L. The mean calculated daily infant dosage was 0.05 mg which is <1% of the maternal weight-adjusted dose or RID.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Fluconazole, Miconazole, Nystatin

### References

1 Scynexis Inc. Pharmacokinetic study in healthy lactating women exposed to ibrexafungerp. 2025. https://clinicaltrials.gov/study/NCT06954493?intr=NCT06954493&rank=1&tab=results#results-overview

## Substance Identification

### Substance Name

Ibrexafungerp

### CAS Registry Number

1207753-03-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents